# Gabapentin

CASRN: 60142-96-3

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that maternal doses of gabapentin up to 2.1 grams daily produce relatively low levels in infant serum. Monitor the infant for drowsiness, adequate weight gain, and developmental milestones, especially in younger, exclusively breastfed infants and when using combinations of anticonvulsant or psychotropic drugs. A single oral dose of either 300 mg or 600 mg given to the mother before cesarean section appeared to have no effect on breastfeeding initiation.[1] An expert consensus guideline indicates that gabapentin is an acceptable choice for refractory restless leg syndrome during lactation.[2]

### Drug Levels

In published reports of anticonvulsant use during breastfeeding, most women were taking a combination of anticonvulsants. Some other anticonvulsants (e.g., phenytoin, carbamazepine) stimulate the metabolism of other drugs including anticonvulsants, whereas others (e.g., valproic acid) inhibit the metabolism of other drugs. Therefore, the relationship of the maternal dosage to the concentration in breastmilk can be quite variable, making calculation of the weight-adjusted percentage of maternal dosage less meaningful than for other drugs in this database.

Maternal Levels. Four women who were taking gabapentin and were 12 to 21 days postpartum and a fifth who was 97 days postpartum had a single breastmilk sample measured just before nursing 10 to 15 hours after the previous evening's dose. Their average dosage of 1.5 grams daily (range 0.6 to 2.1 grams daily) and their average milk level was 4.5 mg/L (range 1.2 to 8.7 mg/L). The authors estimated that a fully breastfed infant would receive a dosage of 0.2 to 1.3 mg/kg daily at the minimum which is equivalent to 1.3 to 3.8% of the maternal weight-adjusted dosage.[3] A follow-up publication by the same authors found a similar degree of gabapentin excretion into breastmilk in 8 breastmilk samples from 3 additional mothers.[4]

A woman took gabapentin 600 mg 3 times daily (36.7 mg/kg daily) plus amitriptyline 2.5 mg daily for 6 weeks beginning in the first few days postpartum for chronic back pain. Eight milk samples (6 foremilk and 2 hindmilk) were obtained over 24 hours. Milk levels varied between about 5 and 7 mg/L. Using the average milk level, a fully breastfed infant would receive a dosage of 0.86 mg/kg daily or 2.34% of the maternal weight-adjusted dosage.[5]

Twenty-six women undergoing a cesarean section received a single 300 mg oral dose of gabapentin preoperatively, followed by 300 mg oral doses every 6 hours for the first 48 hours after delivery as part of a standard analgesia protocol. Maternal plasma was collected before, 0.25, 0.5, 1, 1.5, 2, 4, and 6 hours after a postpartum gabapentin dose. One hundred twenty-five plasma samples from 20 women and 35 milk samples were collected from 15 women during the same dosing interval. The median infant daily doses were 0.002 and 0.014 mg/kg on days 1 and 2, respectively. The median relative infant dosages were 0.02% and 0.11%, respectively.[6]

Infant Levels. Three infants who were 2 to 3 weeks of age and one who was 14 weeks of age were breastfed during maternal use of gabapentin in an average daily dosages of 1575 mg (range 600 mg to 2.1 grams daily). Serum levels were measured after the morning nursing before the mothers' morning dose of gabapentin (10 to 15 hours after the prior evening's dose). One infant had an undetectable (<0.12 mg/L) serum level. The other 3 had an average serum level of 0.27 mg/L, which was below the level of accurate quantification for the assay method. The latter 3 infants' serum levels averaged 7.7% (range 4 to 12%) of their mothers' serum levels.[3] A follow-up publication by the same authors found that gabapentin was undetectable (<0.7 mg/L) in the plasma of 3 additional breastfed infants.[4]

An infant whose mother was taking gabapentin 36.7 mg/kg daily breastfed her infant 6 to 7 times daily with some additional artificial feeding at night. At 1.6 months of age, the infant's plasma gabapentin concentration was 0.4 mg/L which was about 6% of the average maternal plasma concentration.[5]

Women undergoing a cesarean section received a single 300 mg oral dose of gabapentin preoperatively, followed by 300 mg oral doses every 6 hours for the first 48 hours after delivery as part of a standard analgesia protocol. Blood samples were obtained from 9 of their breastfed infants. Six infants had plasma concentrations below the limit of quantification (3 mcg/L). The others had low levels in the range of 5.0 to 68.7 mcg/L.[6]

### Effects in Breastfed Infants

Three infants who were 2 to 3 weeks of age and one who was 14 weeks of age were breastfed during maternal use of gabapentin in an average daily dosages of 1575 mg (range 600 mg to 2.1 grams daily). One infant's mother was also taking topiramate and lorazepam and another infant's mother was taking clonazepam. No adverse effects were noted in any of the infants.[3] A follow-up publication by the same authors found no adverse reactions among 3 additional breastfed infants whose mothers were taking gabapentin during pregnancy and lactation.[4]

An exclusively breastfed 5-day-old infant whose mother was taking gabapentin 1.2 grams and levetiracetam 2.5 grams daily during pregnancy and lactation appeared healthy to the investigators throughout the 6- to 8-week study period.[7]

An infant whose mother was taking gabapentin 36.7 mg/kg daily breastfed her infant 6 to 7 times daily for most of the first 1.6 months of life with some additional artificial feeding at night. The mother was also taking amitriptyline 2.5 mg daily. At 1.6 months of age, the infant was found to be healthy with a weight between the 10th and 25th percentiles, having been at the 50th percentile at birth. His age on the Denver developmental test was the same as his chronological age.[5]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Neuropathic Pain) Carbamazepine; (Seizure Disorder) Carbamazepine, Divalproex, Lamotrigine, Oxcarbazepine, Phenytoin, Valproic Acid

### References

1 Short J, Downey K, Bernstein P, et al. A single preoperative dose of gabapentin does not improve postcesarean delivery pain management: A randomized, double-blind, placebo-controlled dose-finding trial. Anesth Analg 2012;115:1336-42.23011560
2 Picchietti DL, Hensley JG, Bainbridge JL, et al. Consensus clinical practice guidelines for the diagnosis and treatment of restless legs syndrome/Willis-Ekbom disease during pregnancy and lactation. Sleep Med Rev 2015;22:64-77.25553600
3 Öhman I, Vitols S, Tomson T. Pharmacokinetics of gabapentin during delivery, in the neonatal period, and lactation: Does a fetal accumulation occur during pregnancy? Epilepsia 2005;46:1621-4.16190933
4 Öhman I, Tomson T. Gabapentin kinetics during delivery, in the neonatal period, and during lactation. Epilepsia 2009;50 (Suppl. 10):108. doi:10.1111/j.1528-1167.2009.02320.x
5 Kristensen JH, Ilett KF, Hackett LP, et al. Gabapentin and breastfeeding: A case report. J Hum Lact 2006;22:426-8.17062788
6 Silvola R, O'Kane A, Heathman M, et al. Population pharmacokinetics and transfer of gabapentin when used as a pain adjunct for cesarean deliveries. CPT Pharmacometrics Syst Pharmacol 2025;14:551-60.39891423
7 Johannessen SI, Helde G, Brodtkorb E. Levetiracetam concentrations in serum and in breast milk at birth and during lactation. Epilepsia 2005;46:775-7.15857447

## Substance Identification

### Substance Name

Gabapentin

### CAS Registry Number

60142-96-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticonvulsants

Antimanic Agents

GABA Agents